# Fulvestrant

CASRN: 129453-61-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of fulvestrant during breastfeeding. However, because of its potential toxicity in the breastfed infant and its half-life of 40 days, the manufacturer recommends that breastfeeding be discontinued during fulvestrant therapy and for 1 year after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Fulvestrant

### CAS Registry Number

129453-61-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents, Hormonal

Estrogen Receptor Antagonists